# Trazodone

CASRN: 19794-93-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that trazodone levels in milk are low and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months or when doses of 100 mg or less are used at bedtime for sleep. A safety scoring system finds trazodone use to be possible to use cautiously during breastfeeding.[1]

### Drug Levels

Maternal Levels. Six women who were 3 to 8 months postpartum were given 50 mg of trazodone orally and milk samples were taken for 30 hours after administration. Peak trazodone milk levels averaging about 110 mcg/L occurred 2 hours after the dose and milk levels declined with an average half-life of 7.5 hours (range 5.2 to 12.3 hours). The authors estimated that an exclusively breastfed infant would receive a dose of 0.005 mg/kg with this maternal dose or 0.65% of the maternal weight-adjusted dosage.[2] However, this study did not measure the active metabolite of trazodone in milk.

One woman who was 6.5 weeks postpartum and taking trazodone 75 mg daily had her milk measured at an unreported time after her dose. The trazodone concentration in her milk was 40 mcg/L.[3]

A woman took tradodone 50 mg daily at bedtime throughout pregnancy and lactation. She was also taking etizolam 0.5 to 1 mg daily. Breast milk samples were collected 4 times on days 5 and 6 postpartum. Trazodone and its metabolite 1-m-chlorophenylpiperazine (mCPP) milk concentrations measured at 7.2 hours after a dose were 50.2 and 3.2 mcg/L; concentrations at 18.9 hours after the dose were 21.2 and 1.3 mcg/L; concentrations at 20.4 hours after the dose were 18.2 and 0.9 mcg/L; concentrations on day 6 at 29 hours after the dose were 8 and <0.2 mcg/L.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One woman was 6.5 weeks postpartum and taking trazodone 75 mg, venlafaxine 75 mg and quetiapine 75 mg daily before conception, during pregnancy and during breastfeeding. Her breastfed infant's development was tested at 12 months of age with the Bayley Scales. Measurements were within normal limits on the mental, psychomotor and behavior scales.[3]

One infant whose mother took trazodone 200 mg daily for 12 weeks starting at 4 weeks postpartum was followed up at 12 months of age. No adverse effects on growth and development were found.[5]

One exclusively breastfed 15-week-old infant was breastfed during maternal therapy with trazodone 100 mg daily and venlafaxine 150 mg daily. No adverse reactions were reported by the mother or found in the medical records.[6]

A woman took etizolam 1 mg and trazodone 50 mg once daily for 3 months postpartum. Her infant was over 50% breastfed and demonstrated no adverse reactions at the 1- and 3-month checkups. The infant’s Denver Developmental Screening Test II was normal at 6 months of age.[4,7]

### Effects on Lactation and Breastmilk

A nonpregnant woman with depression was treated with citalopram 20 mg daily, then 40 mg daily. Trazodone 50 mg at bedtime was added to treat insomnia and then increased to 100 mg at bedtime. One week later the patient noticed milk leakage from her breasts, which stained her clothing. Her serum prolactin was somewhat elevated, but no other abnormalities were noted. The trazodone dosage was tapered and then discontinued. One month later, the galactorrhea had resolved and her serum prolactin was in the normal range.[8]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[9] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[10] None of the mothers were taking trazodone.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[11]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. (2021). A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther.
2 Verbeeck RK, Ross SG, McKenna EA. (1986). Excretion of trazodone in breast milk. Br J Clin Pharmacol.
3 Misri S, Corral M, Wardrop AA, et al. (2006). Quetiapine augmentation in lactation: A series of case reports. J Clin Psychopharmacol.
4 Saito J, Ishii M, Mito A, et al. (2021). Trazodone levels in maternal serum, cord blood, breast milk, and neonatal serum. Breastfeed Med.
5 Misri S, Sivertz K. (1991). Tricyclic drugs in pregnancy and lactation: A preliminary report. Int J Psychiatry Med.
6 Newport DJ, Ritchie JC, Knight BT, et al. (2009). Venlafaxine in human breast milk and nursing infant plasma: Determination of exposure. J Clin Psychiatry.
7 Saito J, Ishii M, Mito A, et al. (2021). Etizolam levels in maternal serum, cord blood, and breast milk during pregnancy and lactation: A case report. Psychiatry Clin Neurosci.
8 Arslan FC, Uysal EK, Ozkorumak E, et al. (2015). Trazodone induced galactorrhea: A case report. Gen Hosp Psychiatry.
9 Venkatesh KK, Castro VM, Perlis RH, et al. (2017). Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol.
10 Leggett C, Costi L, Morrison JL, et al. (2017). Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact.
11 Grzeskowiak LE, Saha MR, Nordeng H, et al. (2022). Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand.

## Substance Identification

### Substance Name

Trazodone

### CAS Registry Number

19794-93-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors